# Thallous Chloride Tl 201

CASRN: 55172-29-7

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of thallous chloride Tl 201 as a diagnostic agent. Most experts recommend a period of breastfeeding interruption after maternal thallous chloride Tl 201, although some disagreement exists on the exact duration, probably because of the long physical half-life of the radioisotope and variable elimination of the drug from the body. Most current guidelines recommend a breastfeeding abstinence period of 4 days.[1-3] During the period of interruption, the breasts should be emptied regularly and completely. If the mother has expressed and saved milk prior to the examination, she can feed it to the infant during the period of nursing interruption.[4,5] The milk that is pumped by the mother during the time of breastfeeding interruption can either be discarded or stored frozen and given to the infant after 10 physical half-lives, or about 30 days, have elapsed. After doses greater than 150 MBq, consideration of temporarily limiting close contact between the mother and infant.[5]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at background levels, she may safely resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[6]

### Drug Levels

Thallium Tl 201 decays by electron capture with principal photon energies of 69 to 80 and 167 keV and a physical half-life of 3.04 days.[2] The maximum effective half-life of thallous chloride Tl 201 is 43 hours.[5]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Technetium Tc 99m Sestamibi, Technetium Tc 99m Tetrofosmin

### References

1 International Atomic Energy Agency. Radiation Protection and Safety in Medical Uses of Ionizing Radiation, IAEA Safety Standards Series No. SSG-46, IAEA, Vienna. 2018. https://www.iaea.org/publications/11102/radiation-protection-and-safety-in-medical-uses-of-ionizing-radiation
2 Dilsizian V, Metter D, Palestro C, et al. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
3 Stabin MG. Doses from medical radiation sources. https://hps.org/hpspublications/articles/dosesfrommedicalradiation.html. Accessed Nov 6, 2024.
4 Mountford PJ, Coakley AJ. A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun 1989;10:15-27.2645546
5 ARSAC notes for guidance: Good clinical practice in nuclear medicine. Notes for guidance on the clinical administration of radiopharmaceuticals and use of sealed radioactive sources. 2020. https://www.gov.uk/government/publications/arsac-notes-for-guidance
6 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203

## Substance Identification

### Substance Name

Thallous Chloride Tl 201

### CAS Registry Number

55172-29-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Thallium Radioisotopes

Diagnostic Agents